# Trandolapril

CASRN: 87679-37-6

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of trandolapril during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Valsartan

## Substance Identification

### Substance Name

Trandolapril

### CAS Registry Number

87679-37-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin-Converting Enzyme Inhibitors

ACE Inhibitors